# Secnidazole

CASRN: 3366-95-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of secnidazole during breastfeeding and no studies have evaluated adverse effects of secnidazole on the infant during breastfeeding, but presumably they are similar to those of the closely related drug, metronidazole, such as increased risk of oral and rectal Candida infections.

As with metronidazole, concern has been raised about exposure of healthy infants to secnidazole via breastmilk, because of possible mutagenicity and carcinogenicity. Based on the elimination half-life of secnidazole of approximately 17 hours, the manufacturer recommends avoidance of breastfeeding for 96 after a single dose. Other drugs are available for bacterial vaginosis, and can be given vaginally, which should result in lower amounts in breastmilk.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Bacterial Vaginosis) Clindamycin, Metronidazole

## Substance Identification

### Substance Name

Secnidazole

### CAS Registry Number

3366-95-8

### Drug Class

Breast Feeding

Lactation

Anti-Infective Agents

Antiprotozoal Agents

Nitroimidazoles